# Micafungin

CASRN: 235114-32-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of micafungin during breastfeeding. Because micafungin is more than 99% bound to plasma proteins and has poor oral bioavailability, it is unlikely to reach the milk and be absorbed by the infant. Micafungin can safely be given intravenously to infants under 4 months of age. Any amount absorbed from milk is likely to be far less than an infant dose. If a mother requires micafungin, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole

## Substance Identification

### Substance Name

Micafungin

### CAS Registry Number

235114-32-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Echinocandins